# Donidalorsen

CASRN: 2304692-48-4

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the excretion of donidalorsen into breastmilk. Because donidalorsen has a molecular weight of 9112 Da and is over 98% bound to plasma proteins, the amounts in milk are likely to be low. It is also likely to be partially destroyed in the infant's gastrointestinal tract and absorption by the infant is probably minimal. But its half-life is long, so it could accumulate in the infant. If donidalorsen is required by the mother, it is not a reason to discontinue breastfeeding. Until more data become available, an alternate drug may be preferred, especially while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

C1-esterase inhibitor

## Substance Identification

### Substance Name

Donidalorsen

### CAS Registry Number

2304692-48-4

### Drug Class

Breast Feeding

Lactation

Milk, Human

Oligonucleotides